# Thalidomide

CASRN: 50-35-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of thalidomide during breastfeeding. The manufacturer and professional guidelines recommend against the use of thalidomide during breastfeeding [1-3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 van der Woude CJ, Ardizzone S, Bengtson MB, et al. The second European evidenced-based consensus on reproduction and pregnancy in inflammatory bowel disease. J Crohns Colitis 2015;9:107-24.25602023
2 Sammaritano LR, Bermas BL, Chakravarty EE, et al. 2020 American College of Rheumatology Guideline for the Management of Reproductive Health in Rheumatic and Musculoskeletal Diseases. Arthritis Rheumatol 2020;72:529-56.32090480
3 Torres J, Chaparro M, Julsgaard M, et al. European Crohn's and Colitis Guidelines on Sexuality, Fertility, Pregnancy, and Lactation. J Crohns Colitis 2023;17:1-27.36005814

## Substance Identification

### Substance Name

Thalidomide

### CAS Registry Number

50-35-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunosuppressive Agents

Leprostatic Agents

Angiogenesis Inhibitors